# Tizanidine

CASRN: 51322-75-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of tizanidine during breastfeeding. If the mother requires tizanidine, it is not a reason to discontinue breastfeeding. Monitor the infant for drowsiness, adequate weight gain, and developmental milestones, especially in younger, exclusively breastfed infants.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Tizanidine

### CAS Registry Number

51322-75-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics

Anticonvulsants

Muscle Relaxants, Central

Parasympatholytics

Adrenergic alpha-2 Receptor Agonists